# Itraconazole

CASRN: 84625-61-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of itraconazole during breastfeeding. However, limited data indicate that maternal itraconazole produces levels in milk that are less than the 5 mg/kg daily doses that have been recommended to treat infants. Until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. If itraconazole is used during breastfeeding, monitoring of the infant’s liver enzymes should be considered, especially with long courses of therapy.

### Drug Levels

Maternal Levels. An unpublished study reported 2 healthy volunteers who each took 2 oral doses of itraconazole 200 mg 12 hours apart. Milk samples were obtained with a breast pump at 4, 24, and 48 hours after the second dose. The average milk concentrations of itraconazole were 70.2, 27.7, and 16.2 mcg/L, respectively. At 72 hours, the milk level was 20.1 mcg/L in one woman and not detectable (<5 mcg/L) in the other. However, steady-state was probably not attained at the time of sampling, and metabolites including the active hydroxyitraconazole were not measured.[1]

Using data reported in the literature, including the above source, researchers estimated that fully breastfed infants between 3 and 12 months of age would receive 1.48% of the mother's weight-adjusted dosage of itraconazole and attain a plasma concentration of 0.77% of the mother's plasma concentration.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Fluconazole

### References

1 Briggs GG, Freeman RK, Towers CV, et al. Drugs in pregnancy and lactation, 11th ed. Baltimore. Williams & Wilkins. 2017.
2 McNamara PJ, Abbassi M. (2004). Neonatal exposure to drugs in breast milk. Pharm Res.

## Substance Identification

### Substance Name

Itraconazole

### CAS Registry Number

84625-61-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents